# Pegunigalsidase Alfa

CASRN: 1644392-61-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of pegunigalsidase alfa during breastfeeding. Because pegunigalsidase alfa is a large protein molecule with a molecular weight of 116,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Polyethylene glycol is not excreted into breastmilk.[3] If pegunigalsidase alfa is required by the mother, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Clowse ME, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6.28814432

## Substance Identification

### Substance Name

Pegunigalsidase Alfa

### CAS Registry Number

1644392-61-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes